# Aclidinium

CASRN: 727649-81-2

## Drug Levels and Effects

### Summary of Use during Lactation

Although no published data exist on the use of aclidinium during breastfeeding, it produces low maternal serum levels because of rapid hydrolysis to inactive metabolites. The risk to the breastfed infant of maternal aclidinium inhalation is small. Breastfeeding can be continued during aclidinium therapy.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Tiotropium, Umeclidinium

### References

1 Bendien SA, de Kruif MD, Feitsma H, et al. Summary of the Dutch Multidisciplinary Practice Guideline on Asthma and Pregnancy. J Allergy Clin Immunol Pract 2024;12:1751-62 38513758

## Substance Identification

### Substance Name

Aclidinium

### CAS Registry Number

727649-81-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Asthmatic Agents

Parasympatholytics

Muscarinic Antagonists

Bronchodilator Agents